# Indium In 111 Pentetate

CASRN: 135998-32-2

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of indium In 111 pentetate as a diagnostic agent. No information is available on the use of indium In 111 pentetate during breastfeeding. Because of the long half-life of indium 111 and the potential for serious adverse reactions in nursing infants, it is best to avoid the drug in women who wish to continue breastfeeding. If the drug is given, breastfeeding should be discontinued.

### Drug Levels

Indium 111 decays by electron capture with 173 keV and 245 keV gamma emissions and a physical half-life of 2.8 days.[1] The manufacturer reports that 65% of the administered dose is excreted by the kidneys within 24 hours and 85% is excreted in 72 hours.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Indium In 111 Pentetate

### CAS Registry Number

135998-32-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Indium Radioisotopes

Diagnostic Agents